# Tuberculin

CASRN: 92129-86-7

## Drug Levels and Effects

### Summary of Use during Lactation

There is no reason to withhold breastfeeding after tuberculosis skin testing or to avoid skin testing in nursing mothers.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

There is some evidence that breastfed infants can acquire immune responsiveness to tuberculin via breastmilk.[1-3] However, other investigators have found no evidence of breastmilk transfer of immunity.[4]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Martínez-Cairo Cueto, S, Alasio-Chavez C, Davila Velasquez, JR. In vitro transfer of immunity against PPD with dialyzable extract of leukocytes from human colostrum. Rev Alerg 1992;39:126-32.1492196
2 Schlesinger JJ, Covelli HD. Evidence for transmission of lymphocyte responses to tuberculin by breast-feeding. Lancet 1977;310:529-32.95733
3 Masters PL. Maternal transmission of skin sensitivity to tuberculin. Lancet 1982;2:276-7.6124704
4 Keller MA, Rodgriguez AL, Alvarez S, et al. Transfer of tuberculin immunity from mother to infant. Pediatr Res 1987;22:277-81.3658548

## Substance Identification

### Substance Name

Tuberculin

### CAS Registry Number

92129-86-7

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antigens

Purified Protein Derivative